# Sufentanil

CASRN: 56030-54-7

## Drug Levels and Effects

### Summary of Use during Lactation

When used epidurally or intravenously during labor or for a short time immediately postpartum, amounts of sufentanil ingested by the neonate are small and would not be expected to cause any adverse effects in breastfed infants. Labor pain medication may delay the onset of lactation; however, it appears that with good breastfeeding support, epidural sufentanil plus a local anesthetic has little or no effect on breastfeeding success.[1,2] Epidural sufentanil as part of neuraxial analgesia for vaginal delivery may increase the risk of mastitis.[3]

Because of sufentanil’s long half-life during continued intravenous infusion or repeated intravenous administration, sufentanil levels in milk would be expected to increase if used for an extended period postpartum.[1] Maternal use of oral opioids during breastfeeding can cause infant drowsiness, which may progress to rare but severe central nervous system depression. Newborn infants seem to be particularly sensitive to the effects of even small dosages of narcotic analgesics. If sufentanil is required by the mother of a newborn, it is not a reason to discontinue breastfeeding; however, once the mother’s milk comes in, it is best to provide pain control with a nonnarcotic analgesic and limit maternal intake of sufentanil to a few days. If the baby shows signs of increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties, or limpness, a physician should be contacted immediately. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped. Because there is no published experience with repeated doses of intravenous or sublingual sufentanil during established lactation, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Sufentanil is metabolized to a minimally active and inactive metabolites. The oral bioavailability of sufentanil is unknown. Therapeutic plasma levels from intravenous sufentanil during surgery in adults are 0.25 to 8 mcg/L. The usual intravenous dosage of sufentanil for anesthesia in an infant during surgery is 10 to 15 mcg/kg. Lower dosages 0.25 to 1 mcg/kg are used for analgesia. Sufentanil is also commonly administered epidurally. Plasma levels are markedly lower when the epidural route is used.[4]

Maternal Levels. Nine women who had undergone cesarean section received sufentanil 50 mcg epidurally immediately after delivery. Sufentanil was undetectable (<0.1 mcg/L) in colostrum at about 1 hour after the dose.[5]

Twenty-nine women undergoing cesarean section received 20 mcg of epidural sufentanil prior to surgery and were then randomized to receive either an epidural anesthetic combined with sufentanil 3.75 mcg per hour plus 1.25 mcg every 20 minutes as needed via a patient-controlled epidural analgesia (PCEA) device, or an epidural anesthetic alone via PCEA with no sufentanil. Breastmilk was sampled on postpartum days 1, 2 and 3. Sufentanil was detected in breastmilk in all groups. Levels were highest in the group receiving postpartum sufentanil via PCEA; however, cumulative sufentanil dosages were not reported. Milk levels were apparently low in the other 2 groups.[6] Reporting errors in this study do not allow for estimation of infant sufentanil dose from milk.

Two women were treated with intravenous sufentanil postoperatively with a bolus dose of 0.5 mg/kg followed by a continuous infusion of 1 mcg/kg hourly for 79 and 58 hours, respectively. Peak milk concentrations were 57.6 ng/L and 62.2 ng/l at 70 and 45 hours after the start of the infusion, respectively. The calculated cumulative doses that their infants received were 5.14 ng and 6.47 ng, respectively.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Newborns of breastfeeding mothers who received epidural sufentanil before and after cesarean section delivery were reportedly not clinically affected and had no differences in behavior or clinical signs over 3 days postpartum compared to newborns of mothers who received epidural sufentanil prior to delivery only.[6]

### Effects on Lactation and Breastmilk

Narcotics can increase serum prolactin.[8,9] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A national survey of women and their infants from late pregnancy through 12 months postpartum compared the time of lactogenesis II in mothers who did and did not receive pain medication during labor. Categories of medication were spinal or epidural only, spinal or epidural plus another medication, and other pain medication only. Women who received medications from any of the categories had about twice the risk of having delayed lactogenesis II (>72 hours) compared to women who received no labor pain medication.[10]

A nonrandomized convenience sample of women who did (n = 209) or did not (n = 157) receive epidural analgesia during labor was analyzed to determine whether epidurals affected the onset of lactation. Although not standardized, the typical procedure used sufentanil 10 to 15 mg together with either ropivacaine 0.1% or levobupivacaine 0.0625% epidurally, supplemented by epidural boluses of ropivacaine 0.1% or levobupivacaine 0.0625% about every 2 hours. No difference was found in the time of lactation onset between the two groups. Although women in both groups stated they wished to breastfeed prior to delivery, exclusive breastfeeding at 20 days postpartum was less frequent in the women who received an epidural (43%) than in women who did not (57%).[11]

In a study in China, women with a scheduled cesarean section were randomized to receive intravenous patient-controlled analgesia with either sufentanil or tramadol. Postpartum prolactin levels were higher in the tramadol group (348 mcg/L) than in the sufentanil group (314 mcg/L). The onset of lactation was sooner in the tramadol group (21.4 hours) than in the sufentanil group (25.1 hours). Both of these difference were statistically significant.[12] Note that injectable tramadol is not available in the U.S.

A study of 169 pregnant women randomized them to receive one of three solutions as epidural anesthesia during labor. Bupivacaine 0.1% or 0.125% was combined with sufentanil 5 mcg and bupivacaine 0.1% was combined with sufentanil 10 mcg, each in 15 mL. No difference in average LATCH score was found among the infants in the 3 groups.[13]

A retrospective medical record study in China compared women who received patient-controlled epidural analgesia during labor (n = 527) to those who did not (n = 395). Epidural analgesia included 0.1% levobupivacaine and 5 mg of sufentanil in 10 mL of saline. All women completed a questionnaire regarding their breastfeeding experience at 6 months postpartum. There were no statistically significant differences between the groups in the proportion who initiated breastfeeding within 1 hour after birth or who exclusively or partially breastfed their infants at 1, 3, or 6 months postpartum.[14]

An observational study in Sweden compared nursing behaviors of the infants of mothers who received intravenous oxytocin or intramuscular oxytocin with or without receiving epidural analgesia with sufentanil and bupivacaine. Infants of mothers who received oxytocin infusions alone during labor breastfed as well as those of mothers who had no interventions during labor. Mothers who received oxytocin plus epidural analgesia had reduced breastfeeding behaviors and more weight loss at 2 days postpartum than those who did not receive epidural analgesia. The mothers of infants who breastfed well had greater variability in serum oxytocin than those whose infants did not breastfeed well.[15]

A study in China compared an epidural infusion of ropivacaine 700 mcg/hour (n = 76) to sufentanil 1.75 mcg/hour plus ropivacaine 700 mcg/hour (n = 81) during normal vaginal delivery. The combined ropivacaine and sufentanil provided better pain control than ropivacaine alone. Onset of lactation was shorter and lactation adequacy (milk volume) was better in the combined group than in the ropivacaine-only group.[16]

A study of women with gestational diabetes undergoing elective cesarean section randomized them to postoperative patient-controlled analgesia with either intravenous esketamine 0.5 mg/kg, sufentanil 150 mcg and ondansetron 4 mg (n = 70) or sufentanil and ondansetron alone in the same doses (n = 70). There was no difference between the groups in the time to first lactation, with most beginning at 24 to 48 hours after delivery.[17]

A study compared two postoperative analgesia methods (transverse abdominal plane block followed by patient-controlled intravenous analgesia containing either 50 or 100 mcg/100 mL of sufentanil. The serum prolactin was higher after cesarean section in the low-dose group, the time to first colostrum was slightly shorter, and the volume of milk at 48 hours was slightly greater in the low dose group.[18]

A randomized study in women receiving a cesarean section compared postoperative patient-controlled analgesia with hydromorphone 0.2 mg/kg to sufentanil 2 mcg/kg. Both regimens included intravenous palonosetron 4 mcg/kg. The hydromorphone group had higher breastfeeding satisfaction at 72 hours postpartum. The frequency of dizziness and drowsiness within 48 hours also was lower in the hydromorphone group.[19]

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine

### References

1 Zuppa AA, Alighieri G, Riccardi R, . Epidural analgesia, neonatal care and breastfeeding. Ital J Pediatr 2014;40:82.25432659
2 French CA, Cong X, Chung KS. Labor epidural analgesia and breastfeeding: A systematic review. J Hum Lact 2016;32:507-20.27121239
3 Song Q, Li M, Wang Q, . Fentanyl and Sufentanil in Labor Analgesia and Lactational Mastitis Risk: Evidence from a Retrospective Cohort Combined with Network Pharmacology. Breastfeed Med 2026:15568253261483388.42643000
4 Hansdóttir V, Woestenborghs R, Nordberg G. The pharmacokinetics of continuous epidural sufentanil and bupivacaine infusion after thoracotomy. Anesth Analg 1996;83:401-6.8694326
5 Madej TH, Strunin L. Comparison of epidural fentanyl with sufentanil. Anaesthesia 1987;42:1156-61.2963561
6 Cuypers L, Wiebalck A, Vertommen JD, . Epidural sufentanil for postcesarean pain: Breast milk levels and effects on the baby. Acta Aneasthiol Belg 1995;46:104-5.
7 Huang YF, Liao LM, Zeng ML, . Measurement of sufentanil in human milk by liquid chromatography-tandem mass spectrometry. J Biobased Mater Bioenergy 2023;17:492-7. doi:10.1166/jbmb.2023.2287
8 Tolis G, Dent R, Guyda H. Opiates, prolactin, and the dopamine receptor. J Clin Endocrinol Metab 1978;47:200-3.263291
9 Frecska E, Perenyi A, Arato M. Blunted prolactin response to fentanyl in depression. Normalizing effect of partial sleep deprivation. Psychiatry Res 2003;118:155-64.12798980
10 Lind JN, Perrine CG, Li R. Relationship between use of labor pain medications and delayed onset of lactation. J Hum Lact 2014;30:167-73.24451212
11 Mauri PA, Contini NN, Giliberti S, . Intrapartum epidural analgesia and onset of lactation: A prospective study in an Italian birth centre. Matern Child Health J 2015;19:511-8.24894732
12 Chi X, Li M, Mei W, . Comparison of patient-controlled intravenous analgesia with sufentanil versus tramadol in post-cesarean section pain management and lactation after general anesthesia - a prospective, randomized, double-blind, controlled study. J Pain Res 2017;10:1521-7.28740418
13 Wang T, Lu Y, Zhou P, . A randomized controlled comparison of epidural analgesia onset time and adverse reactions during labor with different dose combinations of bupivacaine and sufentanil. Clin J Pain 2020;36:612-7.32349005
14 Xu Q, Wu ZF, Yang NN, . Impact of epidural analgesia during labor on breastfeeding initiation and continuation: A retrospective study. J Matern Fetal Neonatal Med 2020;33:3816-9.30890010
15 Takahashi Y, Uvnäs-Moberg K, Nissen E, . Epidural analgesia with or without oxytocin, but not oxytocin alone, administered during birth disturbs infant pre-feeding and sucking behaviors and maternal oxytocin levels in connection with a breastfeed two days later. Front Neurosci 2021;15:673184.34267623
16 Wen X, Huang B, Liang X. Effect of ropivacaine and sufentanil in epidural labor analgesia. Am J Transl Res 2021;13:7001-7.34306455
17 Han T, Chen Q, Huang J, . Low-dose esketamine with sufentanil for postcesarean analgesia in women with gestational diabetes mellitus: A prospective, randomized, double-blind study. Front Endocrinol (Lausanne) 2023;14:1202734.37635978
18 Guo Y, Zheng J, Wang J, . Transverse abdominal plane block with low-dose sufentanil vs high-dose sufentanil for postcesarean pain: a double-blind study. Am J Obstet Gynecol MFM 2026;8:101823.41326260
19 Zhao Y, Shi J, Zhao H, . Effects of hydromorphone-based patient-controlled intravenous analgesia on postpartum depression after cesarean section: A prospective randomized controlled trial. Front Med (Lausanne) 2026;12:1731005.41601800

## Substance Identification

### Substance Name

Sufentanil

### CAS Registry Number

56030-54-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Anesthetics, Intravenous

Opiates